# Berotralstat

CASRN: 1809010-50-1

## Drug Levels and Effects

### Summary of Use during Lactation

Berotralstat is a plasma kallikrein inhibitor indicated for prophylaxis of hereditary angioedema attacks. No information is available on the excretion of berotralstat into breastmilk. Because berotralstat is about 99% bound to plasma proteins, the amounts in milk are likely to be very low. If berotralstat is required by the mother, it is not a reason to discontinue breastfeeding. Until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

C1-esterase inhibitor

## Substance Identification

### Substance Name

Berotralstat

### CAS Registry Number

1809010-50-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Serine Proteinase Inhibitors